# Posaconazole

CASRN: 171228-49-2

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of posaconazole during breastfeeding. Because posaconazole is more than 98% bound to plasma proteins, the amount in milk is likely to be low. However, there is no published experience with posaconazole during breastfeeding, so an alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Fluconazole, Miconazole

## Substance Identification

### Substance Name

Posaconazole

### CAS Registry Number

171228-49-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antifungal Agents

Trypanocidal Agents

14-alpha Demethylase Inhibitors